# Anifrolumab

CASRN: 1326232-46-5

## Drug Levels and Effects

### Summary of Use during Lactation

Anifrolumab concentration in milk was very low in one mother, consistent with it being a large protein molecule with a molecular weight of 148,000 Da.[1] It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[2] An infant exposed during pregnancy and breastfeeding had no adverse effects. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3] Until more data become available, anifrolumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A woman with systemic lupus erythematosus was treated with prednisolone 6 to 6.5 mg, tacrolimus 4 mg, and hydroxychloroquine 300 mg daily and anifrolumab 300 mg every 4 weeks. Milk samples taken between days 1 and 14 after resuming anifrolumab postpartum ranged from 0.01 to 0.11 mg/L, with the highest concentration 4 days after the dose.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman who had systemic lupus erythematosus received anifrolumab (presumably 300 mg) monthly for 6 months during pregnancy, up to 30 weeks of gestation. Her infant was born at week 38+3 and was exclusively breastfed. Anifrolumab was restarted postpartum at about 1 month postpartum and breastfeeding was continued. Neonatal follow-up remained normal with no recurrent or severe infections. Routine immunizations were administered according to the recommended schedule with no adverse reactions to vaccinations. The rotavirus vaccine was postponed as a precaution because it is a live-attenuated vaccine. Electrocardiogram and growth parameters were normal. Immunological evaluation at 4, 6 and 12 months of age revealed normal complete blood count, apart from mild age-appropriate neutropenia. T-cell subsets (CD4+, naïve CD4+, and CD8+) were slightly reduced compared with age-matched reference values, but progressively increased over time without intervention. Lymphocyte proliferative responses to mitogens and tetanus toxoid were normal. Immunoglobulin levels and vaccine-specific antibody responses (hepatitis B and tetanus) were adequate. Autoimmune screening (antinuclear antibodies and anti-double-stranded DNA) was negative. The child started nursery school at 9 months of age and experienced only minor infectious episodes.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, . A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
4 Higuchi A, Saito J, Kawasaki H, . Limited placental transfer and minimal breast milk concentrations of anifrolumab in a patient with systemic lupus erythematosus. Rheumatology (Oxford) 2026;65:keag251.42135619
5 Cilona MB, Paolino G, Moroni L, . Pregnancy and lactation during anifrolumab treatment in systemic lupus erythematosus. Dermatol Reports 2026

## Substance Identification

### Substance Name

Anifrolumab

### CAS Registry Number

1326232-46-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized